# Valbenazine

CASRN: 1025504-45-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of valbenazine during breastfeeding in humans. Based on animal studies, the manufacturer recommends that breastfeeding be avoided during valbenazine therapy and for 5 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Valbenazine

### CAS Registry Number

1025504-45-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vesicular Monoamine Transporter 2 Inhibitor